# Ornidazole

CASRN: 16773-42-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ornidazole is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. The amount of ornidazole in milk is low after administration of 3 doses totaling 2 grams intravenously perinatally. Measurements of infant plasma levels during breastfeeding have not been reported. No studies have evaluated adverse effects of ornidazole on the infant during breastfeeding, but presumably they are similar to those of the closely related drug, metronidazole, such as increased risk of oral and rectal Candida infections.

As with metronidazole, concern has been raised about exposure of healthy infants to ornidazole via breastmilk,[1] because of possible mutagenicity and carcinogenicity. Opinions vary among experts on the advisability of using ornidazole during longer-term therapy while breastfeeding, but avoidance of breastfeeding for 3 days after a single dose should allow milk levels to drop to negligible values because its half-life is similar to tinidazole.[2] Other drugs are available for bacterial vaginosis, and can be given vaginally, which should result in lower amounts in breastmilk.

### Drug Levels

Maternal Levels. Seventy-seven mothers who had a cesarean section and received ornidazole as one preoperative dose of 1000 mg and two postoperative doses of 500 mg each within 24 hours contributed 123 colostrum and milk samples for analysis. These values were used to create a population pharmacokinetic model of ornidazole excretion into milk. Simulated milk levels with this dosage regimen found the median peak milk levels to be 5.4 mg/L at 27 hours after delivery in patient with normal total bilirubin (<17 micromol/L) and 6.2 mg/L at 33 hours after delivery in patients with abnormal bilirubin (>17 micromol/L).[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 American Academy of Pediatrics Committee on Drugs. The transfer of drugs and other chemicals into human milk. Pediatrics 2001;108:776-89.11533352
2 Evaldson GR, Lindgren S, Nord CE, Rane AT. Tinidazole milk excretion and pharmacokinetics in lactating women. Br J Clin Pharmacol 1985;19:503-7.4039599
3 Li S, Cao M, Zhou Y, et al. Ornidazole transfer into colostrum and assessment of exposure risk for breastfeeding infant: A population pharmacokinetic analysis. Pharmaceutics 2023;15:2524.38004504

## Substance Identification

### Substance Name

Ornidazole

### CAS Registry Number

16773-42-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Antiprotozoal Agents

Nitroimidazoles